# (1-14C)-Triolein

CASRN: 19393-08-9

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of (1-14C)-triolein as a diagnostic agent. Breastfeeding does not need to be suspended after administration of (1-14C)-triolein.[1,2]

### Drug Levels

Carbon 14 is a low-energy beta emitter with a physical half-life of about 5730 years. (1-14C)-triolein has an effective half-life of 15 hours. Approximately 14% of the injected radioactivity is excreted into breastmilk.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Leide-Svegborn S, Ahlgren L, Johansson L, et al. (2016). Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging.
2 Mattsson S, Johansson L, Leide Svegborn S, et al. (2015). Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP.

## Substance Identification

### Substance Name

(1-14C)-Triolein

### CAS Registry Number

19393-08-9

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Carbon Radioisotopes

Diagnostic Agents